# Glyburide

CASRN: 10238-21-8

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that the levels of glyburide in milk are negligible. Monitor breastfed infants for signs of hypoglycemia such as jitteriness, excessive sleepiness, poor feeding, seizures cyanosis, apnea, or hypothermia. If there is concern, monitoring of the breastfed infant's blood glucose is advisable during maternal therapy with hypoglycemic agents.[1,2]

### Drug Levels

Maternal Levels. Eight women who had recently delivered were given a single dose of glyburide 5 mg (n = 6) or 10 mg (n = 2) orally. Glyburide was undetectable (<5 mcg/L) in milk at 2, 4, 6 and 8 hours after the dose. The authors estimated that the maximum dosages that a fully breastfed infant would receive with the 5 and 10 mg doses are <1.5% and <0.7% of the maternal weight-adjusted dosage, respectively.[3,4]

In a separate study reported in the same paper, 3 women who had delivered via cesarean section and were receiving glyburide 5 mg daily in the immediate postoperative period had milk glyburide levels measured. Trough glyburide milk levels were undetectable (<80 mcg/L).[3]

A mother with diabetes caused by a genetic mutation required a very high dose of 85 mg daily of glyburide, which was increased to 90 mg daily during pregnancy. Her milk glyburide levels were 7.3 mcg/L on day 3 postpartum and 3.1 mcg/L on day 6, although the times with respect to the dosage were not reported. The authors estimated that the breastfed infant would receive a daily dosage of less than 0.01 mg daily.[5]

Infant Levels. A preterm infant whose mother was taking a high dose of glyburide of 90 mg daily at delivery was hypoglycemic at birth and required high doses of intravenous glucose for 8 days after birth. The infant was breastfed (extent not stated) and had glyburide serum levels of 9 mcg/L on day 3 postpartum and 9.8 mcg/L on day 19. The authors speculated that breastfeeding might have prolonged the infant's high serum glyburide levels, although they calculated that the infant would have received less than 0.01 mg of the drug daily via breastmilk.[5]

### Effects in Breastfed Infants

The blood glucose level was normal in one breastfed infant whose mothers was taking oral glyburide 5 mg daily.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

### References

1 Everett JA. Use of oral antidiabetic agents during breastfeeding. J Hum Lact 1997;13:319-21.9429368
2 Berlin CM, Briggs GG. Drugs and chemicals in human milk. Semin Fetal Neonatal Med 2005;10:149-59.15701580
3 Feig DS, Briggs GG, Kraemer JM, et al. Transfer of glyburide and glipizide into breast milk. Diabetes Care 2005;28:1851-5.16043722
4 Feig DS, Kraemer JM, Moskovitz DN, et al. The transfer of glyburide into breast milk. Clin Pharmacol Ther 2004;75:P24. doi:10.1016/j.clpt.2003.11.089
5 Myngheer N, Allegaert K, Hattersley A, et al. Fetal macrosomia and neonatal hyperinsulinemic hypoglycemia associated with transplacental transfer of sulfonylurea in a mother with KCNJ11-related neonatal diabetes. Diabetes Care 2014;37:3333-5.25231897

## Substance Identification

### Substance Name

Glyburide

### CAS Registry Number

10238-21-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Sulfonylurea Compounds